# Rimegepant

CASRN: 1289023-67-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of rimegepant during breastfeeding. However, amounts in breastmilk are low and would not be expected to cause any adverse effects in breastfed infants. Some experts recommend withholding breastfeeding for 8 to 12 hours after a dose, although this seems to be too conservative given the small amounts in milk.[1] If rimegepant is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Twelve healthy women volunteers between 2 an6 6 months postpartum were given a single dose of 75 mg of rimegepant orally. Milk samples from complete emptying of both breasts were obtained 15 to 30 minutes before the dose and 1, 2, 4, 8, 12, 16, 24, 32, and 36 hours after the dose. Peak milk rimegepant levels averaged 169.6 mcg/L at an average of 2 hours after the dose. Average milk levels over the first 24 hours after the dose was 34 mcg/L, which translated into an average daily infant dose of 0.005 mg/kg or a relative infant dose of 0.51%.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Topiramate, Valproic Acid; (Migraine Treatment) Eletriptan, Rizatriptan, Sumatriptan, Ubrogepant, Zolmitriptan

### References

1 Ornello R, Maassen van den Brink A, Puledda F, . Migraine management during pregnancy, breastfeeding and in women planning pregnancy. Cephalalgia 2025;45:3331024251393945.41263702
2 Baker TE, Croop R, Kamen L, . Human milk and plasma pharmacokinetics of single-dose rimegepant 75 mg in healthy lactating women. Breastfeed Med 2022;17:277-82.35049333

## Substance Identification

### Substance Name

Rimegepant

### CAS Registry Number

1289023-67-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Calcitonin Gene Related Peptide Receptor Antagonists

CGRP-R Inhibitors